# User and Medical Advice Disclaimer

Information presented in the LactMed database is derived from the scientific literature and public databases and reflects professional expertise of the authors and review panel. The U.S. Government and its individual agencies, including the National Library of Medicine (NLM) and the National Institutes of Health (NIH), and the LactMed authors and reviewers do not warrant or assume any legal responsibility for the accuracy, completeness, or usefulness of the information contained on this site.

NLM does not provide patient-specific medical advice; please consult with a physician or pharmacist for guidance about the use of a medication while breastfeeding. NLM does not endorse particular services or information, and is not responsible for the availability or content of external sites that are provided for the convenience of users. MotherToBaby, a non-profit organization, is a possible resource for your lactation questions ([underlined: mothertobaby.org] or 866-626-6847).

## LactMed Data Usage/Translation

The NLM LitArch Open Access Subset is the preferred access point for bulk downloading the LactMed dataset. Downloading and use of this dataset is completely free of charge. Please review the [underlined: Terms and Conditions] (https://www.nlm.nih.gov/databases/download/terms_and_conditions.html). Downloading of datasets implies agreement to the Terms and Conditions.

Users who intend to translate LactMed information to a language other than English agree to adhere to NLM’s [underlined: Terms and Conditions] (https://www.nlm.nih.gov/databases/download/terms_and_conditions.html), where applicable. Further, users must provide a disclaimer on their website that the NLM and the authors and reviewers of LactMed assume no liability for errors in translation of the data and information contained therein.